# Ivermectin

CASRN: 70288-86-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that ivermectin is poorly excreted into breastmilk after oral administration. Amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants over 7 days of age.[1] No data are available on ivermectin excretion into breastmilk after topical administration, but some expert opinion considers it to be a treatment of choice for scabies during breastfeeding.[2] Avoid application to the breast area where the infant might directly ingest the drug.

### Drug Levels

Maternal Levels. Four mothers who had lost their infants at term were given a single 150 mcg/kg dose of oral ivermectin. Ivermectin was detected in milk within 1 hour after the dose and for 72 hours after the dose. The average peak milk level was 15 mcg/L (range 11 to 21 mcg/L) and occurred 4 hours after the dose in 2 women, 6 hours in another and 12 hours after the dose in the fourth. The mean milk level was 9.85 mcg/L.[3,4] Using the mean milk level data from this study, an exclusively breastfed infant would receive an average dose of 1.47 mcg/kg after a maternal dose of 150 mcg/kg, or 0.98% of the weight-adjusted maternal dose.

A woman was treated for Strongyloides stercoralis with a single oral dose of 200 mcg/kg of ivermectin. She collected milk samples before the dose and at 1, 3, 6, 9, 12 and 24 hours after the dose. A peak level in milk of 20.8 mcg/L occurred 6 hours after the dose. The average concentration over the 24-hour period was 9.26 mcg/L. Using the average milk level data from this study, an exclusively breastfed infant would receive an average dose of 1.39 mcg/kg after a maternal dose of 200 mcg/kg, or 0.7% of the weight-adjusted maternal dose.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Scabies, Pediculosis) Permethrin, Pyrethrins

### References

1 Thomas C, Coates S, Engelman D, et al. Ectoparasites: Scabies. J Am Acad Dermatol 2020;82:533-48.31310840
2 Morand A, Weill A, Miquel J, et al. Management of scabies in children under 15 kg and pregnant or breastfeeding women: recommendations supported by the Centre of Evidence of the French Society of Dermatology. Br J Dermatol 2024;191:1014-16.39028660
3 Ogbuokiri J, Ozumba B, Okonkwo P. Ivermectin levels in human breastmilk. Eur J Clin Pharmacol 1993;45:389-90.8299677
4 Ogbuokiri J, Ozumba B, Okonkwo P. Ivermectin levels in human breast milk. Eur J Clin Pharmacol 1994;46:89-90.8005194
5 Rodari P, Buonfrate D, Pomari E, et al. Ivermectin concentration in breastmilk of a woman with Strongyloides stercoralis and human T-lymphotropic virus-I co-infection. Acta Trop 2020;202:105249.31678122

## Substance Identification

### Substance Name

Ivermectin

### CAS Registry Number

70288-86-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Insecticides

Macrolides